# Gentamicin

CASRN: 1403-66-3

## Drug Levels and Effects

### Summary of Use during Lactation

Gentamicin is poorly excreted into breastmilk. Newborn infants apparently absorb small amounts of gentamicin, but their serum levels with three times daily dosages are far below those attained when treating newborn infections and systemic effects of gentamicin are unlikely. Older infants would be expected to absorb even less gentamicin. Because there is little variability in the milk gentamicin levels during multiple daily dose regimens, timing breastfeeding with respect to the dose is of little or no benefit in reducing infant exposure. Data are not available with single daily dose regimens. Monitor the infant for possible effects on the gastrointestinal flora, such as diarrhea, candidiasis (e.g., thrush, diaper rash) or rarely, blood in the stool indicating possible antibiotic-associated colitis.

Maternal use of an ear drop or eye drop that contains gentamicin presents little or no risk for the nursing infant.[1]

### Drug Levels

Maternal Levels. In 5 or 10 women (article unclear) given a single dose of gentamicin 80 mg intramuscularly in the early postpartum period, average milk levels were 157 mcg/L 1 hour after the dose, 156 mcg/L at 3 hours after the dose, 137 mcg/L at 6 hours after the dose and 3 mcg/L at 12 hours after the dose.[2]

After implantation of 90 gentamicin-impregnated beads into the femur of one mother with osteomyelitis, milk levels ranged from 70 to 190 mcg/L at various times over the following 23-day period.[3]

Ten mothers nursing newborn infants were given prophylactic gentamicin 80 mg intramuscularly 3 times a day. On day 4, milk gentamicin levels were as follows: 420 mcg/L 1 hour after the dose; 480 mcg/L 3 hours after the dose; 490 mcg/L at 5 hours after the dose; and, 410 mcg/L 7 hours after the dose.[4]

Infant Levels. In the infants of 5 or 10 women (article unclear) given a single dose of gentamicin 80 mg intramuscularly, none of the breastfed neonates had detectable gentamicin serum levels.[2]

Ten mothers nursing newborn infants were given prophylactic gentamicin 80 mg intramuscularly 3 times a day. One hour after nursing on day 4, gentamicin was undetectable (<270 mcg/L) in the serum of 5 of the infants and averaged 410 mcg/L (range 340 to 490 mcg/L) in the other five infants who nursed one hour after a maternal dose.[4]

### Effects in Breastfed Infants

Bloody stools in one 5-day-old infant were possibly caused by concurrent maternal administration of clindamycin and gentamicin.[5]

A 2-month-old infant breastfed since birth. His mother had taken many medications during pregnancy, but she did not recall their identity. She developed mastitis and was treated with amoxicillin-clavulanic acid 1 gram orally every 12 hours and gentamicin 160 mg intramuscularly once daily. The infant was breastfed for 10 minutes starting 15 minutes after the first dose of both drugs. About 20 minutes later, the infant developed a generalized urticaria which disappeared after 30 minutes. A few hours later, the infant breastfed again and the urticaria reappeared after 15 minutes and disappeared after an hour. After switching to formula feeding and no further infant exposure to penicillins, the reaction did not reappear with follow-up to 16 months of age. The adverse reaction was probably caused by the antibiotics in breastmilk. The drug that caused the reaction cannot be determined, but it was most likely the amoxicillin-clavulanic acid.[6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Niebyl JR. Use of antibiotic of ear, nose, and throat disorders in pregnancy and lactation. Am J Otolaryngol 1992;13:187-92.1503194
2 Ito T. Absorption and excretion of gentamicin in new-born infants. Jpn J Antibiot 1970;23:298-311.5312214
3 Boda A. Gentamicin concentration in the milk of a mother after treatment by implants of a Septopal chain. Orvosi Hetilap 1990;131:2263-5.2234920
4 Celiloglu M, Celiker S, Guven H, et al. Gentamicin excretion and uptake from breast milk by nursing infants. Obstet Gynecol 1994;84:263-5.8041544
5 Mann CF. Clindamycin and breast-feeding. Pediatrics 1980;66:1030-1.7454470
6 Cherif F, El Aidli, S, Kastalli S, et al. Drug induced urticaria via breastfeeding. Fundam Clin Pharmacol 2009;23 (Suppl. 1):37. doi:10.1111/j.1472-8206.2009.00689.x

## Substance Identification

### Substance Name

Gentamicin

### CAS Registry Number

1403-66-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Aminoglycosides